# Alosetron

CASRN: 122852-42-0

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of alosetron during breastfeeding. Because of relatively high protein binding and only moderate bioavailability, exposure of the breastfed infant is likely to be low. Until more data are available, alosetron should only be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Alosetron

### CAS Registry Number

122852-42-0

### Drug Class

- Breast Feeding
- Lactation
- Gastrointestinal Agents
- Serotonin Antagonists